# Xenon

CASRN: 7440-63-3

## Drug Levels and Effects

### Summary of Use during Lactation

Xenon is an inert gas that has been used for general anesthesia. It was undetectable in breastmilk after extubation of the mothers. Breastfeeding can be resumed as soon as the mother has recovered sufficiently from general anesthesia to nurse.[1] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure.

### Drug Levels

Maternal Levels. Two mothers who underwent general anesthesia were given propofol and remifentanil as induction agents and rocuronium for intubation. After induction, propofol was stopped and xenon inhalation was used to maintain anesthesia for 57 and 59 minutes, respectively. Xenon was undetectable in breastmilk at 0 and 300 minutes after extubation in both mothers.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four mothers who underwent general anesthesia were given propofol and remifentanil as induction agents and rocuronium for intubation. After induction, propofol was stopped and xenon inhalation was used to maintain anesthesia for between 57 and 70 minutes. Infants resumed breastfeeding from 1.5 to 5 hours after the end of surgery. None of the infants had noticeable symptoms of dizziness or drowsiness. All infants fared well at home after their mothers were discharged.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Dalal PG, Bosak J, Berlin C. (2014). Safety of the breast-feeding infant after maternal anesthesia. Paediatr Anaesth.
2 Stuttmann R, Schafer C, Hilbert P, et al. (2010). The breast feeding mother and xenon anaesthesia: Four case reports. Breast feeding and xenon anaesthesia. BMC Anesthesiol.

## Substance Identification

### Substance Name

Xenon

### CAS Registry Number

7440-63-3

### Drug Class

Breast Feeding

Lactation

Anesthetics, Inhalation

Elements

Gases